# Theanine

CASRN: 3081-61-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of theanine or l-theanine during breastfeeding. The amounts found in green tea are likely acceptable during nursing, but the amounts from high-dose l-theanine supplements are not necessarily safe for the breastfed infant. Since the half-life of theanine is about 1 hour, it should be mostly eliminated from the milk in 3 to 5 hours. It is probably best to avoid using theanine or l-theanine while nursing a newborn or preterm infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Theanine

### CAS Registry Number

3081-61-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies